# Naproxen

CASRN: 22204-53-1

## Drug Levels and Effects

### Summary of Use during Lactation

Limited information indicates that levels of naproxen in breastmilk are low and adverse effects in breastfed infants are apparently uncommon. However, because of naproxen’s long half-life and reported serious adverse reaction in a breastfed neonate, other agents may be preferred while nursing a newborn or preterm infant.

### Drug Levels

Maternal Levels. Peak milk naproxen levels in a 5-month postpartum patient were 1.1 to 1.3 mg/L while taking oral naproxen 250 mg twice daily and 2.4 mg/L with a dose of 375 mg twice daily. Peak milk levels occurred 4 to 5 hours after the dose and fell slowly over 12 to 24 hours. From urinary excretion data the authors estimated that the infant received 0.26% of the mother’s total dose or 1.9% of the maternal weight-adjusted dosage.[1,2] Using the peak milk level data, the estimated maximum intake of an exclusively breastfed infant would be 2.2 to 2.8% of the maternal weight-adjusted dosage, not including the contribution of any glucuronide metabolite.

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Naproxen possibly caused prolonged bleeding time, thrombocytopenia and acute anemia in one 7-day-old infant of a mother also taking bacampicillin.[3]

In one telephone follow-up study of 20 infants (ages not stated) exposed to naproxen during breastfeeding, 2 mothers reported drowsiness and 1 reported vomiting in their infants. None of the reactions required medical attention.[4]

### Effects on Lactation and Breastmilk

A randomized study compared naproxen and tramadol for post-cesarean section pain. Patients received the drugs either on a fixed schedule or as needed. No difference in breastfeeding rates were seen among the groups.[5]

### Alternate Drugs to Consider

Acetaminophen, Celecoxib, Diclofenac, Flurbiprofen, Ibuprofen, Indomethacin, Piroxicam

### References

1 Jamali F, Tam YK, Stevens RD. Naproxen excretion in breast milk and its uptake by suckling infant. Drug Intell Clin Pharm 1982;16:475
2 Jamali F, Stevens DR. Naproxen excretion in milk and its uptake by the infant. Drug Intell Clin Pharm 1983;17:910–1 6653409
3 Fidalgo I, Correa R, Gómez Carrasco, JA, . Acute anemia, rectorrhagia and hematuria caused by ingestion of naproxen. An Esp Pediatr 1989;30:317–9 2787136
4 Ito S, Blajchman A, Stephenson M, . Prospective follow-up of adverse reactions in breast-fed infants exposed to maternal medication. Am J Obstet Gynecol 1993;168:1393–9 8498418
5 Sammour RN, Ohel G, Cohen M, . Oral naproxen versus oral tramadol for analgesia after cesarean delivery. Int J Gynaecol Obstet 2011;113:144–7 21435642

## Substance Identification

### Substance Name

Naproxen

### CAS Registry Number

22204-53-1

### Drug Class

Breast Feeding

Lactation

Milk, Human

Analgesic Agents

Anti-inflammatory Agents, Nonsteroidal